# Bromazepam

CASRN: 1812-30-2

## Drug Levels and Effects

### Summary of Use during Lactation

Bromazepam is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. Three partially breastfed infants were apparently not adversely affected by bromazepam in milk. However, the death of a newborn infant breastfed by a mother who was apparently using bromazepam was reported. If a mother of an older infant requires bromazepam, it is not a reason to discontinue breastfeeding; however, because of its relatively long half-life, an alternate drug is preferred, especially when nursing a newborn, preterm or sick infant.

### Drug Levels

Maternal Levels. Three women who were partially breastfeeding their infants were taking bromazepam during pregnancy and postpartum in dosages of 1 or 2 mg three times daily. Random milk samples were obtained mostly in the first few days postpartum, but some samples were taken as long as the 40^th^ day postpartum. Milk concentrations ranged from 4.2 to 53.4 mcg/L and single-point RID values ranged from 1.1 to 3.9%.

Infant Levels. Three infants whose mothers were taking bromazepam during pregnancy and postpartum in dosages of 1 or 2 mg three times daily were partially breastfed. In the first infant (maternal dose 1 mg 3 times daily), serum concentrations of 44.5 and 48.8 mcg/L in the first day postpartum probably represent placental transfer. In the second infant (maternal dose 2 mg 3 times daily), a level of 54.8 mcg/L in the first 0.1 day postpartum probably also represents placental passage. A second sample of 43.9 mcg/L taken 2.6 days postpartum at 65.2 hours after the mother’s last dose may reflect both transplacental and breastmilk passage. Three serum samples of 2.1. 3.1, and 16.1 mcg/L on the 40^th^ day postpartum may reflect breastmilk passage better than other reported values among these three infants. In the third infant (maternal dose 2 mg 3 times daily), serum concentrations of 13 to 32.7 mcg/L between days 3 and 5 postpartum might reflect both transplacental and breastmilk passage.[1]

### Effects in Breastfed Infants

A 4-week-old infant with a 5-day history of near-miss sudden infant death syndrome was brought to the emergency room with asystole and unresponsive pupils. Despite resuscitation, the infant died. The infant’s serum contained a plasma concentration of 0.38 mcg/mL of “diazepam equivalents” and the infant’s urine was positive for bromazepam. The mother appeared to have been taking sedatives over the last few days, while partially breastfeeding, because of nervousness and sleeplessness.[2] Bromazepam probably contributed to the infant’s death.[3]

Three infants whose mothers were taking bromazepam during pregnancy and postpartum in dosages of 1 or 2 mg three times daily were partially breastfed. No abnormalities were found at the 1-month and the 3-month checkups of any of the infants.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Anxiety) Lorazepam, Oxazepam, Temazepam

### References

1 Saito J, Miura R, Sandaiji N, et al. Transfer of bromazepam to cord blood and breast milk: A case series of bromazepam serum levels and outcomes in newborns and breastfed infants. J Hum Lact 2026;42:485–91.41871204
2 Martens PR. A sudden infant death like syndrome possibly induced by a benzodiazepine in breast-feeding. Eur J Emerg Med 1994;1:86–7.9422145
3 Anderson PO, Pochop SL, Manoguerra AS. Adverse drug reactions in breastfed infants: Less than imagined. Clin Pediatr (Phila) 2003;42:325–40.12800727

## Substance Identification

### Substance Name

Bromazepam

### CAS Registry Number

1812-30-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Anxiety Agents

Benzodiazepines

GABA Modulators

Hypnotics and Sedatives